# Pamabrom

CASRN: 606-04-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of pamabrom during breastfeeding. If the mother requires pamabrom, it is not a reason to discontinue breastfeeding. Monitor the infant for excessive urination, adequate weight gain and skin rash.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Pamabrom

### CAS Registry Number

606-04-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Diuretics